# Methamphetamine

CASRN: 537-46-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is no published experience with methamphetamine as a therapeutic agent during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. One expert recommends that amphetamines not be used therapeutically in nursing mothers.[1]

Methamphetamine should not be used as a recreational drug by nursing mothers because it may impair their judgment and childcare abilities. Methamphetamine and its metabolite, amphetamine, are detectable in breastmilk and infant serum after abuse of methamphetamine by nursing mothers. However, these data are from random collections rather than controlled studies because of ethical considerations in administering recreational methamphetamine to nursing mothers. Other factors to consider are the possibility of positive urine tests in breastfed infants which might have legal implications, and the possibility of other harmful contaminants in street drugs. Breastfeeding is generally discouraged in mothers who are actively abusing amphetamines.[2-5] In mothers who abuse methamphetamine while nursing, withholding breastfeeding for 48 hours after the maternal use or for 24 hours after a negative maternal urine screen for amphetamines.[6,7]

### Drug Levels

Methamphetamine is metabolized to several metabolites, including the active metabolite, amphetamine.

Maternal Levels. Two nursing mothers who were intravenous methamphetamine abusers collected milk samples just before methamphetamine injection and every 2 to 6 hours after injection for 24 hours. Because the drugs were illicit street drugs, the doses of methamphetamine were not known. Peak and average milk methamphetamine concentrations were about 160 mcg/L and 111 mcg/L in one woman and 610 mcg/L and 281 mcg/L in the other, respectively. Milk methamphetamine concentrations fell with half-lives of 13.6 and 7.4 hours, respectively. Amphetamine, thought to be derived from metabolism of methamphetamine, was present in relatively constant concentrations in the milk of both mothers, averaging 4 and 15 mcg/L, respectively. The authors estimated that the infants would have received daily dosages of 16.7 and 42.2 mcg/kg of methamphetamine and 0.8 and 2.5 mcg/kg of amphetamine, respectively.[7] These estimated mg/kg infant doses of methamphetamine are lower than therapeutic doses of the equipotent dextroamphetamine for older children with attention deficit hyperactivity disorder. However, this is not evidence of safety for breastfed infants because the data on these two women cannot be extrapolated to other methamphetamine abusers.

Thirty-three mothers in Thailand were identified who had predelivery urine drug screens positive for methamphetamine. On average they used methamphetamine 2.4 times per week, primarily by smoking crushed tablets. Of these, 22 had undetectable postpartum methamphetamine milk levels. Of the 11 mothers with methamphetamine in breastmilk, only two mothers had more than 1 consecutive milk samples containing methamphetamine that were analyzed. The mothers had smoked methamphetamine (dosage uncertain) 53 and 68 hours prior to delivery, respectively. First milk samples contained 142 and 345 mcg/L of methamphetamine in the two mothers. The half-lives of methamphetamine in breastmilk were 11.3 and 40.3 hours, respectively. The authors estimated that in the first 24 hours after birth their exclusively breastfed infant would have received daily dosages of 59.3 mcg or 21.3 mcg/kg in the first case and 93.0 mcg or 51.7 mcg/kg in the second case, although the authors used an unrealistically high milk intake for a 1-day-old infant to estimate the dose. Methamphetamine became undetectable in breastmilk about 100 hours after the last drug use in both mothers, which was about one day prior to the mothers' urine becoming negative for methamphetamine.[6]

Milk from 2 mothers suspected of methamphetamine abuse were analyzed by 5 different methods. In one sample, the average methamphetamine concentration was 327 mcg/L (range 294 to 347 mcg/L), and the average amphetamine concentration was 79.9 mcg/L (range 74.9 to 88.4 mcg/L). In the second sample, the average methamphetamine concentration from 3 of the methods was 3.8 mcg/L (range 3.4 to 4.1 mcg/L) and the average amphetamine concentration from 2 of the methods was 1 mcg/L. The other methods did not detect the drugs.[8]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A 2-month-old infant whose mother used illicit street methamphetamine recreationally by nasal inhalation was found dead 8 hours after a small amount of breastfeeding and ingestion of 120 to 180 mL of formula. The infant's serum methamphetamine concentration on autopsy was 39 mcg/L. Although the infant's mother was convicted of child endangerment for the use of methamphetamine during breastfeeding, the role that methamphetamine played in the infant's death has been questioned because of the low infant serum methamphetamine concentration and the mother's alleged minimal breastfeeding.[9,10]

South Australian government pathologists reported the death of a breastfed infant who was co-sleeping with its mother. Methamphetamine was found in a “significant” concentration in the infant on autopsy and the drug in breastmilk was thought to be potentially contributory to the death. These authors also reported that in prior deaths of infants under 12 months of age, detectable methamphetamine and its metabolite, amphetamine, may have been partially obtained via breastmilk.[11] Pathologists from the New Zealand government confirmed similar findings in their country.[12]

Two deaths were reported over 10 years in Taiwan in breastfed infants who were exposed to methamphetamine in breastmilk. One was a 3-month-old male infant who died with a postmortem methamphetamine blood level of 0.142 mg/L. The other was a one-month-old female who had postmortem levels of 0.023 mg/L of methamphetamine and 0.014 g/dL of alcohol. The cause of death was sudden infant death syndrome.[13]

### Effects on Lactation and Breastmilk

A single oral dose of 0.2 mg/kg to a maximum of 17.5 mg of d-methamphetamine was given to 6 subjects (4 male and 2 female). Serum prolactin concentrations were unchanged over a period of 300 minutes after the dose.[14]

In 2 papers by the same authors, 20 women with normal physiologic hyperprolactinemia were studied on days 2 or 3 postpartum. Eight received dextroamphetamine 7.5 mg intravenously, 6 received 15 mg intravenously and 6 who served as controls received intravenous saline. The 7.5 mg dose reduced serum prolactin by 25 to 32% compared to control, but the difference was not statistically significant. The 15 mg dose significantly decreased serum prolactin by 30 to 37% at times after the infusion. No assessment of milk production was presented. The authors also quoted data from another study showing that a 20 mg oral dose of dextroamphetamine produced a sustained suppression of serum prolactin by 40% in postpartum women.[15,16]

A study compared 31 methamphetamine-dependent subjects to 23 non-dependent subjects. The serum prolactin concentrations in the methamphetamine-dependent subjects were elevated at days 2 and 30 of abstinence. The elevation was greater in women than in men.[17] The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

In a retrospective Australian study, mothers who used intravenous amphetamines during pregnancy were less likely to be breastfeeding their newborn infants at discharge than mothers who abused other drugs (27% vs 42%). The cause of this difference was not determined.[18]

A prospective, multicenter study followed mothers who used methamphetamine prenatally (n = 204) to those who did not (n = 208). Infants exposed to methamphetamine exhibited poor suck, excessive suck and more jitteriness compared to nonexposed infants. Mothers who used methamphetamine were less likely to breastfeed their infants (38%) at hospital discharge than those who did not use methamphetamine (76%).[19]

### Alternate Drugs to Consider

(ADHD) Amphetamine, Dextroamphetamine, Lisdexamfetamine, Methylphenidate

### References

1 Ornoy A. Pharmacological treatment of attention deficit hyperactivity disorder during pregnancy and lactation. Pharm Res 2018;35:46.29411149
2 ACOG Committee on Health Care for Underserved Women. Committee Opinion No. 479: Methamphetamine abuse in women of reproductive age. Obstet Gynecol 2011;117:751–5.21343793
3 Oei JL, Kingsbury A, Dhawan A, et al. Amphetamines, the pregnant woman and her children: A review. J Perinatol 2012;32:737–47.22652562
4 AAP Section on Breastfeeding. Breastfeeding and the use of human milk. Pediatrics 2012;129:e827–41.22371471
5 Wong S, Ordean A, Kahan M. SOGC clinical practice guidelines: Substance use in pregnancy: No. 256, April 2011. Int J Gynaecol Obstet 2011;114:190–202.21870360
6 Chomchai C, Chomchai S, Kitsommart R. Transfer of methamphetamine (MA) into breast milk and urine of postpartum women who smoked MA tablets during pregnancy: Implications for initiation of breastfeeding. J Hum Lact 2016;32:333–9.26452730
7 Bartu A, Dusci LJ, Ilett KF. Transfer of methylamphetamine and amphetamine into breast milk following recreational use of methylamphetamine. Br J Clin Pharmacol 2009;67:455–9.19371319
8 Bavlovič Piskáčková H, Nemeškalová A, Kučera R, et al. Advanced microextraction techniques for the analysis of amphetamines in human breast milk and their comparison with conventional methods. J Pharm Biomed Anal 2022;210:114549.34998075
9 Ariagno R, Karch SB, Middleberg R, et al. Methamphetamine ingestion by a breast-feeding mother and her infant's death: People v Henderson. JAMA 1995;274:215.7609223
10 Green LS. People v Henderson: The prosecution responds. JAMA 1996;275:183–4.8604164
11 Kenneally M, Byard RW. Increasing methamphetamine detection in cases of early childhood fatalities. J Forensic Sci 2020;65:1376–8.32202648
12 Tse R, Kesha K, Morrow P, et al. Commentary on: Kenneally M, Byard RW. Increasing methamphetamine detection in cases of early childhood fatalities. J Forensic Sci 2020;65:1384.32510633
13 Wei SY, Hu HY, Pan CH. Underage deaths associated with substance-related harm in Taiwan: A national 10-year study. Addiction 2026;121:1920–6.41755806
14 Gouzoulis-Mayfrank E, Thelen B, Habermeyer E, et al. Psychopathological, neuroendocrine and autonomic effects of 3,4-methylenedioxyethylamphetamine (MDE), psilocybin and d-methamphetamine in healthy volunteers. Results of an experimental double-blind placebo-controlled study. Psychopharmacology (Berl) 1999;142:41–50.10102781
15 DeLeo V, Cella SG, Camanni F, et al. Prolactin lowering effect of amphetamine in normoprolactinemic subjects and in physiological and pathological hyperprolactinemia. Horm Metab Res 1983;15:439–43.6642414
16 Petraglia F, De Leo V, Sardelli S, et al. Prolactin changes after administration of agonist and antagonist dopaminergic drugs in puerperal women. Gynecol Obstet Invest 1987;23:103–9.3583091
17 Zorick T, Mandelkern MA, Lee B, et al. Elevated plasma prolactin in abstinent methamphetamine-dependent subjects. Am J Drug Alcohol Abuse 2011;37:62–7.21142706
18 Oei J, Abdel-Latif ME, Clark R, et al. Short-term outcomes of mothers and infants exposed to antenatal amphetamines. Arch Dis Child Fetal Neonatal Ed 2010;95:F36–F41.19679891
19 Shah R, Díaz SD, Arria A, et al. Prenatal methamphetamine exposure and short-term maternal and infant medical outcomes. Am J Perinatol 2012;29:391–400.22399214

## Substance Identification

### Substance Name

Methamphetamine

### CAS Registry Number

537-46-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Street Drugs

Sympathomimetics

Dopamine Agents

Central Nervous System Stimulants

Adrenergic Agents

Wakefulness-Promoting Agents